# Ioxilan

CASRN: 107793-72-6

## Drug Levels and Effects

### Summary of Use during Lactation

Intravenous iodinated contrast media are poorly excreted into breastmilk and poorly absorbed orally so they are not likely to reach the bloodstream of the infant or cause any adverse effects in breastfed infants. Guidelines developed by several professional organizations state that breastfeeding need not be disrupted after a nursing mother receives an iodine-containing contrast medium.[1-4] However, because there is no published experience with ioxilan during breastfeeding, other agents may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Diatrizoate, Iohexol

### References

1 Webb JA, Thomsen HS, Morcos SK, et al. (2005). The use of iodinated and gadolinium contrast media during pregnancy and lactation. Eur Radiol.
2 Chen MM, Coakley FV, Kaimal A, et al. (2008). Guidelines for computed tomography and magnetic resonance imaging use during pregnancy and lactation. Obstet Gynecol.
3 Copel J, El-Sayed Y, Heine RP, et al. (2017). Committee Opinion No. 723: Guidelines for diagnostic imaging during pregnancy and lactation. Obstet Gynecol.
4 American College of Radiology Committee on Drugs and Contrast Media. Administration of contrast media to breast-feeding mothers. In, ACR manual on contrast media. 2022;Version 2022:106-7. https://www.acr.org/Clinical-Resources/Contrast-Manual

## Substance Identification

### Substance Name

Ioxilan

### CAS Registry Number

107793-72-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Contrast Media

Diagnostic Agents